# Respiratory Syncytial Virus Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

The Centers for Disease Control and Prevention and other expert opinion state that vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants and that breastfeeding is not a contraindication to respiratory syncytial virus vaccine.[1,2] Of the two available vaccines, the adjuvanted vaccine (Arexvy) is indicated only for persons over 60 years of age and the nonadjuvanted vaccine (Abrysvo) is indicated for pregnant persons and for persons over 60 years of age. Neither vaccine contains live organisms and non-live vaccines are generally considered to be acceptable during breastfeeding.[3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
2 Jamieson DJ, Munoz FM, Rasmussen SA. Maternal immunization. Obstet Gynecol 2026 41712936
3 Anderson PO. Maternal vaccination and breastfeeding. Breastfeed Med 2019;14:215–7.30888205

## Substance Identification

### Substance Name

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines